# Voclosporin

CASRN: 515814-01-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the excretion of voclosporin into breastmilk. Because voclosporin has a molecular weight of 1214 Da and is 97%, plasma protein bound, it is unlikely to enter breastmilk in large amounts. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azathioprine, Cyclosporine, Tacrolimus, Prednisone

## Substance Identification

### Substance Name

Voclosporin

### CAS Registry Number

515814-01-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents